# Antivenin Micrurus Fulvius

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of antivenin Micrurus fulvius (coral snake antivenin) during breastfeeding. Because it is a mixture of large protein molecules, the amounts in milk are likely to be very low.[1] They are also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson P. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Antivenin Micrurus Fulvius

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antidotes

Antivenins